# Valsartan

CASRN: 137862-53-4

## Drug Levels and Effects

### Summary of Use during Lactation

Milk levels after the lowest dose of the combination of valsartan and sacubitril (Entresto) are very low. If the highest recommended maternal dosage (6 times greater) produces proportionate milk levels, they would likely still be quite low. Valsartan is unlikely to affect the nursing infant.

### Drug Levels

Maternal Levels. Five mothers taking sacubitril 24 mg and valsartan 26 mg (Entresto) twice daily collected milk samples at 0,1, 2, 4, 6, 8, 10, and 12 hours after taking a dose at steady state. Sacubitril and its active metabolite, LBQ657, were found in the samples, but valsartan was undetectable (<0.19 mcg/L) in all milk samples.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Two women taking sacubitril 24 mg and valsartan 26 mg (Entresto) did not observe any symptoms in their breastfed infants. Their extent of breastfeeding was not reported.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Candesartan, Captopril, Benazepril, Enalapril, Lisinopril, Quinapril

### References

1 Falconi S, Okimi A, Wesley S, et al. The concentration of maternal sacubitril/valsartan transferred into human milk is negligible. Front Public Health 2024;12:1389513 38841677

## Substance Identification

### Substance Name

Valsartan

### CAS Registry Number

137862-53-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Angiotensin II Type 1 Receptor Blockers

Angiotensin Receptor Blockers

ARBs